# Clopidogrel

CASRN: 120202-66-6

## Drug Levels and Effects

### Summary of Use during Lactation

Information from two mothers indicates that minute quantities of clopidogrel and its metabolites are excreted into milk and one breastfed infant had trivial serum levels. Two mothers and the manufacturer reported that no adverse effects have been observed in breastfed infants with maternal clopidogrel use during lactation in two cases. If a mother requires clopidogrel, it is not a reason to discontinue breastfeeding, but monitor the infant for bruising or bleeding.

### Drug Levels

Maternal Levels. Milk samples were obtained over a 24-hour period from two nursing mothers who were taking clopidogrel 75 mg daily. In the first patient, milk collections were done at 7 and 9 months postpartum. At 220 days months postpartum, clopidogrel concentrations ranged from 0.03 to 1.11 mcg/L, clopidogrel carboxylic acid concentrations ranged from 1.5 to 22.44 mcg/L and clopidogrel active metabolite concentrations were below the limit of quantification (<0.008 mcg/L). At 288 days postpartum, clopidogrel concentrations ranged from 0.42 to 10.46 mcg/L, clopidogrel carboxylic acid concentrations ranged from 1.25 to 36.32 mcg/L and clopidogrel active metabolite concentrations were below the limit of quantification (<0.008 mcg/L) in 5 samples and 0.18 mcg/L in 1 sample. In the second patient, milk samples taken at 435 days postpartum, clopidogrel concentrations ranged from 0.02 to 1.69 mcg/L, clopidogrel carboxylic acid concentrations ranged from 1.43 to 26.96 mcg/L and clopidogrel active metabolite concentrations were below the limit of quantification (<0.008 mcg/L). Relative infant dosages averaged 0.008% for clopidogrel and 0.071% when the two metabolites were included.[1]

Infant Levels. An infant aged 14 months was partially breastfed by a mother taking clopidogrel 75 mg daily. A blood sample was obtained from the infant. The concentrations in the infant blood sample were clopidogrel <0.01 mcg/L, CAMD <0.01 mcg/L, and clopidogrel carboxylic acid 0.05 mcg/L.[1]

### Effects in Breastfed Infants

Two infants aged 7 to 14 months were partially breastfed by mothers taking clopidogrel 75 mg daily. No adverse health issues were reported for either infant by their mothers.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspirin

### References

1 Van Neste M, Nauwelaerts N, Mols R, et al. Clopidogrel transfer into human milk: Case series – a contribution from the ConcePTION project. Front Pharmacol 2025;16:1499243.40235546

## Substance Identification

### Substance Name

Clopidogrel

### CAS Registry Number

120202-66-6

### Drug Class

Lactation

Breast Feeding

Milk, Human

Platelet Aggregation Inhibitors

Purinergic P2Y Receptor Antagonists